# Bevacizumab

CASRN: 216974-75-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the intravenous use of bevacizumab during breastfeeding. Because bevacizumab is a large protein molecule with a molecular weight of about 149,000 Da, the amount in milk is likely to be very low.[1] It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2,3] Until more data become available, intravenous bevacizumab should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant. The manufacturer recommends that breastfeeding be discontinued during systemic bevacizumab therapy and for 6 months following the last dose.

Bevacizumab is a vascular endothelial growth factor (VEGF) inhibitor. A few infants have been breastfed, without apparent harm, following maternal intravitreal bevacizumab injections. Bevacizumab is undetectable in the milk after intravitreal injection, but VEGF levels in breastmilk can be suppressed following the injection. Since VEGF is present in human milk and is thought to help in maturation of the infant’s gastrointestinal tract, concern has been raised about the maternal use of VEGF inhibitors during breastfeeding. Bevacizumab has the greatest systemic exposure and longest half-life of the VEGF inhibitors used in the eye, and thus might be the least desirable alternative.[4,5] Note that the typical alternative to breastmilk is infant formula, which contains no VEGF.

### Drug Levels

Maternal Levels. A woman was given an intravitreal injection of bevacizumab for scar-associated choroidal neovascularization in her left eye. Her breastfed infant was 12 weeks old at the start of therapy. The bevacizumab dose and interval were not stated in the published report, but the usual intravitreal dose is 1.25 mg. After the first injection, bevacizumab was detectable in the milk at a relatively constant 5 mcg/L over 42 days with a peak between 6 and 7 mcg/L at about 2 weeks following injection.[6]

Two women received intravitreal injections of bevacizumab 1.25 mg at 1- to 2-month intervals while breastfeeding. Breastmilk samples were obtained one day before and one week after injections for 6 months in one and 16 months in the other woman. Bevacizumab was undetectable (<3 mcg/L) in any of the samples.[7]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A 33-year-old woman was treated with 14 intravitreal bevacizumab injections of 1.25 mg over a 20-month period. Five of these injections were given while she was breastfeeding (age of infant not stated). No mention was made of adverse effects in this infant, but she became pregnant again, received 3 additional injections, and delivered an infant who developed normally at 12 months of age.[8]

A woman was given 3 intravitreal injections of bevacizumab for scar-associated choroidal neovascularization in her left eye. Her breastfed infant was 12 weeks old at the start of therapy. No mention was made of adverse effects in this infant.[6]

Two women received intravitreal injections of bevacizumab 1.25 mg at 1- to 2-month intervals while breastfeeding. They breastfed their infants (extent not stated) for several months. No adverse effects in the infants were noted.[7]

A woman who was 8 weeks postpartum received a single injection of intravitreal bevacizumab (dose not stated) intraoperatively and continued to breastfeed for an unspecified time. Her infant did well while followed up to 12 months of age.[9]

### Effects on Lactation and Breastmilk

A woman was given an intravitreal injection of bevacizumab (probably 1.25 mg) for scar-associated choroidal neovascularization in her left eye. After the injection, the VEGF level in breastmilk decreased from 13.3 to 8.6 mcg/L over a 2-week period after. After changing therapy to ranibizumab and administration of doses at 8 and 14 weeks after the start of therapy, no decrement in breastmilk VEGF was seen.[6]

### Alternate Drugs to Consider

(Intravitreal) Aflibercept, Ranibizumab

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199–207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591–3.33956488
3 Pistilli B, Bellettini G, Giovannetti E, et al. Chemotherapy, targeted agents, antiemetics and growth-factors in human milk: How should we counsel cancer patients about breastfeeding? Cancer Treat Rev 2013;39:207–11.23199900
4 Dalal PJ, Patel AL, Carle M, et al. Review of ophthalmic and breastfeeding medicine evidence: Real and theoretical risks of intravitreal anti-VEGF administration in lactating women. Retina 2020;40:2065–9.32796446
5 Avery RL, Castellarin AA, Steinle NC, et al. Systemic pharmacokinetics and pharmacodynamics of intravitreal aflibercept, bevacizumab, and ranibizumab. Retina 2017;37:1847–58.28106709
6 Ehlken C, Martin G, Stahl A, et al. Reduction of vascular endothelial growth factor A in human breast milk after intravitreal injection of bevacizumab but not ranibizumab. Arch Ophthalmol 2012;130:1226–7.22965611
7 McFarland TJ, Rhoads AD, Hartzell M, et al. Bevacizumab levels in breast milk after long-term intravitreal injections. Retina 2015;35:1670–3.25830694
8 Tarantola RM, Folk JC, Boldt HC, et al. Intravitreal bevacizumab during pregnancy. Retina 2010;30:1405–11.20924262
9 Ong AY, Kiire CA, Frise C, et al. Intravitreal anti-vascular endothelial growth factor injections in pregnancy and breastfeeding: A case series and systematic review of the literature. Eye (Lond) 2024;38:951–63.37980398

## Substance Identification

### Substance Name

Bevacizumab

### CAS Registry Number

216974-75-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Angiogenesis Inhibitors

Antibodies, Monoclonal

Antineoplastic Agents